# Tividenofusp

CASRN: 2641020-57-5

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of tividenofusp during breastfeeding. Because it is a peptide, it is likely metabolized in the infant’s gastrointestinal tract and poorly absorbed orally. Tividenofusp has been given safely to infants intravenously as young as 3 months old in clinical trials. If a mother requires tividenofusp, it is not a reason to discontinue breastfeeding. Monitor the infant for any possible side effects.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Tividenofusp

### CAS Registry Number

2641020-57-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Enzymes

Enzyme Replacement Therapy

Iduronate Sulfatase